# Iodixanol

CASRN: 92339-11-2

## Drug Levels and Effects

### Summary of Use during Lactation

Intravenous iodinated contrast media are poorly excreted into breastmilk and poorly absorbed orally so they are not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. One report of very small amounts of iodine from iodixanol in breastmilk supports this generalization. Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium.[1-4]

### Drug Levels

Maternal Levels. A mother was given 100 mL of iodixanol (containing 320 mg of iodine per mL) intravenously immediately postpartum for diagnosis of severe abdominal pain. She was found to have a hematoma resulting in acute tubular necrosis with a serum creatinine of 2.5 mg/dL (222 micromoles/L). Breastmilk samples taken on days 1 and 4 postpartum contained 55 and 28 mg/L of iodine, respectively. The authors calculated that the infant would receive 0.017% of the total administered maternal dose of iodine on day 1 and 0.05% on day 4 postpartum.[5] However, these values could be somewhat different in a patient with normal kidney function.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diatrizoate, Iohexol

### References

1 Webb JA, Thomsen HS, Morcos SK, et al. (2005). The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol.
2 Chen MM, Coakley FV, Kaimal A, et al. (2008). Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol.
3 Copel J, El-Sayed Y, Heine RP, et al. (2017). Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol.
4 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2022;Version 2022:106-7. https://www.acr.org/Clinical-Resources/Contrast-Manual
5 Chruscicki A, Morton AR, Akbari A, et al. (2017). Composition of human breast milk in acute kidney injury. Obstet Med.

## Substance Identification

### Substance Name

Iodixanol

### CAS Registry Number

92339-11-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents